# Ebola Zaire Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of Ebola Zaire vaccine during breastfeeding. Breastfeeding is not a contraindication to Ebola Zaire vaccine. The decision regarding whether to vaccinate a lactating woman should involve consideration of the woman’s risk for exposure to Ebolavirus.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ebola Zaire Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines